# Mirtazapine

CASRN: 61337-67-5

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal doses of up to 120 mg daily produce low levels in milk and would not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months. If mirtazapine is required by the mother, it is not a reason to discontinue breastfeeding. A safety scoring system finds mirtazapine use to be possible during breastfeeding.[1] Exclusively breastfed infants should be monitored for behavioral side effects and adequate growth if this drug is used during lactation.

### Drug Levels

Maternal Levels. A woman who was 14 weeks postpartum was started on mirtazapine 30 mg daily. After reaching steady-state (therapy duration not specified), a foremilk level of 7 mcg/L and hindmilk level of 18 mcg/L were measured 22 hours after the previous dose. The next day, a foremilk level of 28 mcg/L and hindmilk level of 34 mcg/L were measured 15 hours after the previous dose.[2]

Eight nursing mothers who averaged 6.3 months postpartum (range 1.5 to 13 months) were taking mirtazapine in an average dosage of 495 mcg/kg daily (30 to 120 mg daily). Mothers provided milk samples every 3 to 4 hours for 24 hours after their daily dose. Using these data, the authors estimated that an exclusively breastfed infant would receive an average of 8 mcg/kg daily of mirtazapine and 3 mcg/kg daily of desmethylmirtazapine. These values averaged 1.5% (range 0.6 to 2.8%) of the maternal weight-adjusted dosage for mirtazapine and 0.4% (range 0.1 to 0.7%) for desmethylmirtazapine. Mirtazapine's concentration in hindmilk averaged 2.3 times the foremilk concentration in 4 of the subjects tested. Desmethylmirtazapine's concentration in hindmilk was only 10% higher than in foremilk.[3]

A woman who was 6 weeks postpartum was taking mirtazapine 22.5 mg daily at night. Foremilk and hind milk levels of mirtazapine were 130 and 145 mcg/L, respectively, at 4 hours after the dose and 61 and 90 mcg/L at 10 hours after the dose.[4]

A woman took mirtazapine 15 to 30 mg daily throughout the second and third trimesters of pregnancy and during breastfeeding. Her postpartum dose was 15 mg daily or 224 mcg/kg daily. In the morning, 12 hours after the dose, the concentration of mirtazapine in her foremilk was 15 mcg/L.[5]

Infant Levels. A woman who was 14 weeks postpartum was started on mirtazapine 30 mg daily. The patient breastfed her 6.8 kg infant 6 times daily during therapy and an infant plasma level of 0.2 mcg/L was found 15 hours after a dose, which was 0.8% of the maternal serum concentration.[2]

Eight infants who averaged 6.3 months of age (range 1.5 to 13 months) were breastfed (extent not stated) by mothers taking mirtazapine in an average dosage of 495 mcg/kg daily for 6 to 129 days. No mirtazapine or desmethylmirtazapine were detected (<1 mcg/L) in the serum of 4 infants whose mothers' doses ranged from 309 to 517 mcg/kg daily. Three others had unquantifiable levels in milk. One infant, whose mother was taking 1967 mcg/kg daily, had 1.5 mcg/L of mirtazapine in serum, but an unquantifiable serum level of the metabolite.[3]

A 6-week-old infant was exclusively breastfed by a mother who was taking mirtazapine 22.5 mg at daily at night. Mirtazapine was undetectable in the infant's plasma 12.5 hours after the dose.[4]

A 2-month-old infant was breastfed (extent not stated) by a mother who was taking mirtazapine 15 mg (224 mcg/kg) daily at night. The infant's serum mirtazapine concentration at 2 hours after the first morning feeding (14 hours after the previous maternal dose) was 10 mcg/L compared to a maternal serum mirtazapine concentration of 27 mcg/L at 12 hours after the previous dose.[5]

### Effects in Breastfed Infants

A 14-week old infant was breastfed 6 times daily during maternal treatment with mirtazapine 30 mg daily. After 6 weeks of therapy, the infant was judged to have normal psychomotor development and no adverse effects, including sedation or abnormal weight gain.[2]

Eight infants who averaged 6.3 months of age (range 1.5 to 13 months) were breastfed by mothers taking mirtazapine in an average dosage of 495 mcg/kg daily for 6 to 129 days. At the time they were studied, the average Denver developmental age in the 7 infants studied averaged 101% of normal. No adverse effects were noted in any of the infants.[3]

A 6-week-old infant was exclusively breastfed by a mother who was taking mirtazapine 22.5 mg at daily at night beginning at 4 weeks postpartum. Weekly follow-ups of the infant found no sedation or alterations in weight gain, although the infant's weight was consistently below the 25th percentile even before mirtazapine was begun.[4]

A 2-month-old infant was breastfed (extent not stated) by a mother taking 15 mg of mirtazapine daily during pregnancy and lactation. The mother stated that the infant had a higher birthweight and gained weight more rapidly than her previous 3 infants, and that unlike her other infants, this infant slept through the night at this age. The authors noted that these observations cannot necessarily be attributed to mirtazapine.[5]

In a case series of 55 women who took mirtazapine during pregnancy and postpartum, 24 of their 56 infants were exclusively breastfed and 20 were partially breastfed. Of the infants who were exposed in utero during the third trimester, those who were breastfed either partially or exclusively had a lower frequency of poor neonatal adaptation syndrome than those who were exclusively formula fed. No sleeping or feeding problems were seen in any of the infants.[6]

A case series reported 8 women who received paroxetine 20 mg and mirtazapine 15 mg daily for various psychiatric disorders. The women breastfed (extent not stated) their infants who averaged 4.3 weeks of age. Follow-up of the infants after 3 to 6 weeks when mirtazapine was discontinued found one infant who experienced restlessness after 5 days of therapy according to the mother. Discontinuation of mirtazapine had no effect, but the symptoms disappeared when paroxetine was discontinued. No other infants had other adverse effects observed.[7]

### Effects on Lactation and Breastmilk

Gynecomastia, hyperprolactinemia and galactorrhea were reported in an 89-year-old man after 21 months of therapy with mirtazapine 30 mg daily. Symptoms regressed 1 month after discontinuation and prolactin levels normalized.[8]

A 28-year-old female inpatient developed galactorrhea, mastodynia, fatigue, and extended subcutaneous edema of the trunk and extremities 4 weeks after adjusting her mirtazapine dose to 30 mg daily. At this time her morning serum prolactin level was not elevated; however, 12 days later, morning serum prolactin was 32.1 mcg/L (normal range 4.79-23.3 mcg/L). Serum prolactin normalized, and edema and galactorrhea remitted within 1 week after discontinuing mirtazapine and starting escitalopram. Pituitary tumor was ruled out. Mirtazapine was probably the cause of the patient's symptoms.[9] The clinical relevance of these findings in nursing mothers is not known. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

An observational study looked at outcomes of 2859 women who took an antidepressant during the 2 years prior to pregnancy. Compared to women who did not take an antidepressant during pregnancy, mothers who took an antidepressant during all 3 trimesters of pregnancy were 37% less likely to be breastfeeding upon hospital discharge. Mothers who took an antidepressant only during the third trimester were 75% less likely to be breastfeeding at discharge. Those who took an antidepressant only during the first and second trimesters did not have a reduced likelihood of breastfeeding at discharge.[10] The antidepressants used by the mothers were not specified.

A retrospective cohort study of hospital electronic medical records from 2001 to 2008 compared women who had been dispensed an antidepressant during late gestation (n = 575; mirtazapine n = 12) to those who had a psychiatric illness but did not receive an antidepressant (n = 1552) and mothers who did not have a psychiatric diagnosis (n = 30,535). Women who received an antidepressant were 37% less likely to be breastfeeding at discharge than women without a psychiatric diagnosis, but no less likely to be breastfeeding than untreated mothers with a psychiatric diagnosis.[11]

In a study of 80,882 Norwegian mother-infant pairs from 1999 to 2008, new postpartum antidepressant use was reported by 392 women and 201 reported that they continued antidepressants from pregnancy. Compared with the unexposed comparison group, late pregnancy antidepressant use was associated with a 7% reduced likelihood of breastfeeding initiation, but with no effect on breastfeeding duration or exclusivity. Compared with the unexposed comparison group, new or restarted antidepressant use was associated with a 63% reduced likelihood of predominant, and a 51% reduced likelihood of any breastfeeding at 6 months, as well as a 2.6-fold increased risk of abrupt breastfeeding discontinuation. Specific antidepressants were not mentioned.[12]

### Alternate Drugs to Consider

Nortriptyline, Paroxetine, Sertraline

### References

1 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118-e126.30601177
2 Aichhorn W, Whitworth AB, Weiss U, Stuppaeck C. Mirtazapine and breast-feeding. Am J Psychiatry 2004;161:2325.
3 Kristensen JH, Ilett KF, Rampono J, et al. Transfer of the antidepressant mirtazapine into breast milk. Br J Clin Pharmacol 2007;63:322-7.16970569
4 Klier CM, Mossaheb N, Lee A, Zernig G. Mirtazapine and breastfeeding: Maternal and infant plasma levels. Am J Psychiatry 2007;164:348-9.
5 Tonn P, Reuter SC, Hiemke C, Dahmen N. High mirtazapine plasma levels in infant after breast feeding: Case report and review of the literature. J Clin Psychopharmacol 2009;29:191-2.19512989
6 Smit M, Wennink H, Heres M, et al. Mirtazapine in pregnancy and lactation: Data from a case series. J Clin Psychopharmacol 2015;35:163-7.25689290
7 Uguz F. Short-term safety of paroxetine plus low-dose mirtazapine during lactation. Breastfeed Med 2019;14:131-2.30489153
8 Lynch A, Madjlessi A. [Gynecomastia-galactorrhea during treatment with mirtazapine]. Presse Med 2004;33:458.15105766
9 Schroeder K, Huber CG, Jahn H. Mirtazapine-induced galactorrhea: A case report. J Neuropsychiatry Clin Neurosci 2013;25:E13-4.
10 Venkatesh KK, Castro VM, Perlis RH, Kaimal AJ. Impact of antidepressant treatment during pregnancy on obstetric outcomes among women previously treated for depression: An observational cohort study. J Perinatol 2017;37:1003-9.28682318
11 Leggett C, Costi L, Morrison JL, et al. Antidepressant use in late gestation and breastfeeding rates at discharge from hospital. J Hum Lact 2017;33:701-9.28984528
12 Grzeskowiak LE, Saha MR, Nordeng H, et al. Perinatal antidepressant use and breastfeeding outcomes: Findings from the Norwegian Mother, Father and Child Cohort Study. Acta Obstet Gynecol Scand 2022;101:344-54.35170756

## Substance Identification

### Substance Name

Mirtazapine

### CAS Registry Number

61337-67-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents

Antidepressive Agents, Second-Generation

Adrenergic alpha-2 Receptor Antagonists

Serotonin 5-HT2 Receptor Antagonists

Serotonin 5-HT3 Receptor Antagonists